# Quniagolide

CASRN: 87056-78-8

## Drug Levels and Effects

### Summary of Use during Lactation

Quinagolide is not approved for marketing in the US by the US Food and Drug Administration. It is selective dopamine D_2_ receptor that reduces serum prolactin. Quinagolide is usually not used during breastfeeding because it suppresses lactation. No published information was found on the use of quinagolide in nursing mothers.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

A small preliminary study compared quinagolide (CV 205-502) to bromocriptine for 21 days starting in the first day postpartum in mothers who did not wish to breastfeed. Serum prolactin normalized more rapidly with bromocriptine and more women had breast symptoms with quinagolide. Efficacy in suppressing lactation was similar between the groups.[1]

### References

1 van der Heijden PF, Kremer JA, Brownell J, Rolland R. Lactation inhibition by the dopamine agonist CV 205-502. Br J Obstet Gynaecol 1991;98:270-6.1673628

## Substance Identification

### Substance Name

Quinagolide

### CAS Registry Number

87056-78-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Dopamine Agonists